# Pyrantel

CASRN: 22204-24-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pyrantel pamoate during breastfeeding. It is poorly absorbed orally, so excretion into breastmilk and absorption by the breastfed infant is unlikely.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Albendazole, Mebendazole

### References

1 Porto I. (2003). Antiparasitic drugs and lactation: Focus on anthelmintics, scabicides, and pediculicides. J Hum Lact.

## Substance Identification

### Substance Name

Pyrantel

### CAS Registry Number

22204-24-6

### Drug Class

Breast Feeding

Lactation

Antinematodal Agents

Antiparasitic Agents